# Imdevimab

CASRN: 2415933-40-1

## Drug Levels and Effects

### Summary of Use during Lactation

The distribution of casirivimab and imdevimab was stopped in January of 2022 because of a lack of efficacy against SARS-CoV-2 variants. Imdevimab is a monoclonal antibody given together with casirivimab. Both are directed against the SARS-CoV-2 virus that causes COVID-19. Casirivimab and imdevimab transiently increased anti-receptor-binding domain IgG titers in one woman. Because imdevimab is a large protein molecule, the amount in milk is likely to be very low.[1] It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal.[2]

### Drug Levels

Maternal Levels. A nursing mother received the Pfizer-BioNTech COVID-19 vaccine about 1.8 months postpartum followed by the second dose in the primary series. From 60 day postpartum, she had a poor IgG antibody response against the receptor binding domain to the vaccine compared to a matched control woman. At day 216 postpartum, she tested positive for SARS-CoV-2 and on day 222, she received an intravenous infusion of casirivimab 600 mg and imdevimab 600 mg. Her milk anti-receptor-binding domain IgG titers increased markedly before returning to her baseline at about 560 days postpartum.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An unvaccinated Japanese woman who was 36 weeks and 6 days pregnant developed COVID-19 and was given an intravenous dose of casirivimab and imdevimab (Ronapreve) for her COVID-19 infection. Her infant was born 5 days later and separated from her. Approximately 10 days after the dose, she began breastfeeding her infant. At 30 days of age, the infant was in good health.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Nirmatrelvir, Remdesevir

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488
3 Marshall NE, Blanton MB, Doratt BM, et al. Monoclonal antibody therapy of breastfeeding patient infected with SARS-CoV-2: A case report. Breastfeed Med 2023;18:626-30.37615569
4 Ogawa E, Goto H, Ushimaru H, et al. Vaginal delivery after improvement in COVID-19 by monoclonal antibody treatment: A case report and literature review. J Infect Chemother 2022;28:982-6.35288022

## Substance Identification

### Substance Name

Imdevimab

### CAS Registry Number

2415933-40-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antibodies, Viral

Antiviral Agents